# Typhoid Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

In general, vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to typhoid vaccine. Breastfed infants should be vaccinated according to the routine recommended schedules.[1,2] Mothers with high preexisting antibody titers may not respond to the oral vaccine.

### Drug Levels

Maternal Levels. Six mothers were given 3 doses of injectable inactivated whole cholera vaccine (Swedish National Bacteriological Laboratory) at 3-week intervals. They also received 3 doses of oral typhoid vaccine (Vivotif Berne, Berne, Swiss Serum and Vaccine Institute. Berne, Switzerland) on days 1, 3, and 5. Milk IgA antibody titers peaked in the first milk sample at 2 weeks after the first dose in 3 women and there was virtually no response in the other three. IgA antibodies were polymeric and short-lived (4 to 6 weeks).[3]

Thirty lactating Pakistani women were vaccinated with 3 doses of oral typhoid vaccine (Vivotif Berne, Berne, Swiss Serum and Vaccine Institute. Berne, Switzerland) on days 1, 3, and 5 alone or in combination with injectable cholera vaccine. All mothers had high preimmunization antibody titers of IgG, IgM and IgA against the S. typhi 21 a in serum, as well as slgA antibodies in both saliva and breast milk. After vaccination, 5 mothers responded with an increase in their milk sIgA levels and 7 showed a decrease after the vaccination. The lack of or negative response to vaccination was thought to be due to prior gut exposure to typhoid.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[2,5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gruslin A, Steben M, Halperin S, et al. Immunization in pregnancy: No. 220, December 2008. Int J Gynaecol Obstet 2009;105:187–91.19367691
2 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
3 Mascart-Lemone F, Carlsson B, Jalil F, et al. Polymeric and monomeric IgA response in serum and milk after parenteral cholera and oral typhoid vaccination. Scand J Immunol 1988;28:443–8.3194704
4 Hahn-Zoric M, Carlsson B, Jalil F, et al. The influence on the secretory IgA antibody levels in lactating women of oral typhoid and parenteral cholera vaccines given alone or in combination. Scand J Infect Dis 1989;21:421–6.2587944
5 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478

## Substance Identification

### Substance Name

Typhoid Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines